# Lornoxicam

CASRN: 70374-39-9

## Drug Levels and Effects

### Summary of Use during Lactation

Lornoxicam is not marketed in the United States, but is available in other countries. No information is available on the clinical use of lornoxicam during breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

## Substance Identification

### Substance Name

Lornoxicam

### CAS Registry Number

70374-39-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal